# Liraglutide

CASRN: 204656-20-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of liraglutide during breastfeeding. Because liraglutide is a large peptide molecule with a molecular weight of 3751 daltons, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant’s gastrointestinal tract. Until more data become available, liraglutide should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Some experts recommend closely monitoring of infant growth and developmental milestones and the nutritional status of the lactating woman.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Maslin K, Shawe J, Blowers S, . Incretin-based medications in women and reproduction: A systematic scoping review and consensus guidelines for clinical practice. Obes Rev 2026:e70203.42528099

### Alternate Drugs to Consider

(Diabetes) Acarbose, Colesevelam, Glipizide, Glyburide, Insulin, Metformin, Miglitol, Semaglutide, Tirzepatide

## Substance Identification

### Substance Name

Liraglutide

### CAS Registry Number

204656-20-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Incretins

Glucagon-Like Peptide-1 Agonists

GLP-1 Agonists